# Ferric Pyrophosphate Citrate

CASRN: 1332-96-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of ferric pyrophosphate citrate during breastfeeding and the manufacturer recommends that it not be used during breastfeeding. An alternate intravenous drug with more published data available may be preferred. For additional information on iron use during breastfeeding, see the monograph on Iron Salts.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ferric Carboxymaltose, Ferric Derisomaltose, Iron Sucrose

## Substance Identification

### Substance Name

Ferric Pyrophosphate Citrate

### CAS Registry Number

1332-96-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Ferric Compounds

Hematinics

Iron Compounds